# Diphenoxylate

CASRN: 915-30-0

## Drug Levels and Effects

### Summary of Use during Lactation

No data exist on the use of diphenoxylate during breastfeeding. One expert panel considers diphenoxylate to be unacceptable during breastfeeding while another found it to be potentially toxic.[1,2] Based on its chemical and pharmacological similarity to narcotics, occasional small doses of diphenoxylate may be acceptable while breastfeeding an older infant, but alternatives are preferred, especially while nursing a newborn. Withdrawal symptoms can occur in breastfed infants when maternal administration of an opioid analgesic is stopped, or when breastfeeding is stopped.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Loperamide

### References

1 Lewis JH, Weingold AB and the Committee of FDA-Related Matters American College of Gastroenterology. The use of gastrointestinal drugs during pregnancy and lactation. Am J Gastroenterol 1985;80:912-23.2864852
2 Mahadevan U, Kane S. American Gastroenterological Association Institute Technical Review on the Use of Gastrointestinal Medications in Pregnancy. Gastroenterology 2006;131:283-311.16831611

## Substance Identification

### Substance Name

Diphenoxylate

### CAS Registry Number

915-30-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antidiarrheals

Gastrointestinal Agents

Narcotics